# Prazosin

CASRN: 19216-56-9

## Drug Levels and Effects

### Summary of Use during Lactation

Because little is available on the use of prazosin during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. The manufacturer reports that one mother was studied and excreted at most 3% of the dose into her breastmilk. No study details were presented.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. Prazosin does not affect serum prolactin concentration in patients with hypertension.[2,3] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs

(Hypertension) Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Hydrochlorothiazide, Methyldopa, Propranolol

### References

1 Schaefer C, Peters P, Miller RK. Drugs during pregnancy and lactation: Treatment options and risk assessment, 3rd ed. Boston: Academic Press; 2015:716.
2 Barbieri C, Caldara R, Ferrari C, et al. Metabolic effects of prazosin. Clin Pharmacol Ther 1980;27:313-6.6102000
3 Barbieri C, Ferrari C, Borzio M, et al. Metabolic effects of chronic prazosin treatment. Horm Metab Res 1980;12:331-4.6105121

## Substance Identification

### Substance Name

Prazosin

### CAS Registry Number

19216-56-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic alpha-Antagonists

Antihypertensive Agents